# Imipramine

CASRN: 50-49-7

## Drug Levels and Effects

### Summary of Use during Lactation

Milk levels of imipramine and its metabolite are low and have not been detected in the serum of breastfed infants. Immediate side effects have not been reported and a limited amount of follow-up has found no adverse effects on infant growth and development. Imipramine use during breastfeeding would usually not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. A safety scoring system finds imipramine use to be possible during breastfeeding.[1] Some experts consider imipramine one of the antidepressants of choice for nursing mothers.[2] However, other agents may be preferred when large doses are required or while nursing a newborn or preterm infant.

### Drug Levels

Imipramine is metabolized to desipramine which has antidepressant activity equal to that of imipramine. Desipramine is metabolized to 2-hydroxydesipramine which has antidepressant activity equal to that of desipramine.[3]

Maternal Levels. Two women who were taking imipramine 50 mg daily for panic disorder had imipramine and desipramine breastmilk levels measured 1 month postpartum (time after dose not stated). In one, levels of impramine and desipramine were 91 and 185 mcg/L, respectively. In the other only trace quantities were detected.[4]

A mother who was 1 month postpartum began taking imipramine for depression. Sixteen days after initiation, milk imipramine plus desipramine levels ranged from 21 to 59 mcg/L at various times while taking a dose of 200 mg daily. There was no clear-cut relationship of milk levels to the time since the dose.[5]

Four mothers who were taking imipramine in doses of 75 to 150 mg daily had milk samples taken 12 to 15 hours after their daily dose. Milk imipramine plus desipramine levels ranged from 48 to 622 mcg/L, with little correlation to dosage. Foremilk levels were lower than hindmilk levels.[6] Using the hindmilk data from this study, an exclusively breastfed infant would receive an estimated maximum of 2.9% of the maternal weight-adjusted dosage.

Infant Levels. Two infants had serum level measurements of imipramine plus desipramine while breastfeeding. One infant whose mother began imipramine 75 mg daily 2 weeks postpartum and was breastfed for 7 weeks had a serum level of 0.6 mcg/L. Another infant was breastfed for 17 weeks after his mother began imipramine 100 mg daily 8 weeks postpartum and later decreased to 75 mg daily. His average of 3 serum levels was 5.5 mcg/L (range 3.3 to 7.4 mcg/L). Time after the dose was not stated.[6]

One 5.9-week-old infant who was breastfed 10 to 12 times daily had no detectable serum imipramine or desipramine (both <25 mcg/L) during maternal use of imipramine 75 mg daily. Another 17-week-old infant who was breastfed 10 to 12 times daily had no detectable serum imipramine (<20 mcg/L) or desipramine (<35 mcg/L) during maternal use of imipramine 150 mg daily.[7]

### Effects in Breastfed Infants

No behavioral or physical changes were noted in a 6-week-old breastfed infant whose mother had been taking imipramine 200 mg daily at bedtime for 15 days.[5]

Follow-up for 1 to 3 years in 14 breastfed infants whose mothers were taking imipramine in an average dosage of 161 mg daily (range 125 to 225 mg daily) found no adverse effects on growth and development.[8]

Four infants were breastfed for 7 to 18 weeks during maternal use of imipramine 75 to 150 mg daily starting at 2 weeks (3 infants) and 8 weeks (1 infant) postpartum. Formal testing indicated no adverse effects on infant development up to 30 months of age. The mother of 1 infant was taking haloperidol along with imipramine 150 mg daily.[6]

In another study, 25 infants whose mothers took a tricyclic antidepressant during pregnancy and lactation were tested formally between 15 to 71 months and found to have normal growth and development. Some of the mothers were taking imipramine.[9]

Six postpartum mothers diagnosed with panic disorder were successfully treated with imipramine 25 to 35 mg (mean 28 mg) daily starting at a mean of 5.9 weeks postpartum. Mothers were treated for a mean of 9.3 weeks. All mothers reported that no adverse effects occurred in their infants.[10]

### Effects on Lactation and Breastmilk

Imipramine has caused increased prolactin levels and gynecomastia in nonpregnant, nonnursing patients.[11,12] Galactorrhea has been reported rarely.[13,14] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[15] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[16] None of the mothers were taking imipramine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[17]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
2 Lanza di Scalea T, Wisner KL. (2009). Pharmacotherapy of postpartum depression. Expert Opin Pharmacother.
3 Weissman AM, Levy BT, Hartz AJ, et al. (2004). Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry.
4 Ware MR, DeVane CL. (1990). Imipramine treatment of panic disorder during pregnancy. J Clin Psychiatry.
5 Sovner R, Orsulak PJ. (1979). Excretion of imipramine and desipramine in human breast milk. Am J Psychiatry.
6 Yoshida K, Smith B, Craggs M, et al. (1997). Investigation of pharmacokinetics and possible adverse effects in infants exposed to tricyclic antidepressants in breast-milk. J Affect Disord.
7 Birnbaum CS, Cohen LS, Bailey JW, et al. (1999). Serum concentrations of antidepressants and benzodiazepines in nursing infants: A case series. Pediatrics.
8 Misri S, Sivertz K. (1991). Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med.
9 Nulman I, Rovet J, Stewart DE, et al. (2002). Child development following exposure to tricyclic antidepressants or fluoxetine throughout fetal life: A prospective, controlled study. Am J Psychiatry.
10 Uguz F, Aydin A, Ak M, et al. (2016). Low-dose imipramine for the treatment of panic disorder during postpartum period: A retrospective analysis of 6 cases. J Clin Psychopharmacol.
11 Turkington RW. (1972). Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med.
12 Turkington RW. (1972). Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab.
13 Klein JJ, Segal RL, Warner RR. (1964). Galactorrhea due to imipramine. Report of a case. N Engl J Med.
14 Mahasuar R, Majhi P, Ravan JR. (2010). Euprolactinemic galactorrhea associated with use of imipramine and escitalopram in a postmenopausal woman. Gen Hosp Psychiatry.
15 Venkatesh KK, Castro VM, Perlis RH, et al. (2017). Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol.
16 Leggett C, Costi L, Morrison JL, et al. (2017). Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact.
17 Grzeskowiak LE, Saha MR, Nordeng H, et al. (2022). Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Imipramine

### CAS Registry Number

50-49-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic